# Glycerol Phenylbutyrate

CASRN: 611168-24-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of glycerol phenylbutyrate during breastfeeding. Because of the potential for serious adverse reactions in a breastfed infant, breastfeeding is not recommended during treatment with glycerol phenylbutyrate.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Glycerol Phenylbutyrate

### CAS Registry Number

611168-24-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Phenylbutyrates